# Loteprednol

CASRN: 129260-79-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the ophthalmic use of loteprednol during breastfeeding. Because absorption from the eye is limited, ophthalmic loteprednol would not be expected to cause any adverse effects in breastfed infants. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Prednisolone

## Substance Identification

### Substance Name

Loteprednol

### CAS Registry Number

129260-79-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Inflammatory Agents

Corticosteroids, Ophthalmic

Glucocorticoids